# Meperidine

CASRN: 57-42-1

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous meperidine during labor can interfere with nursing and maternal use of meperidine during breastfeeding can sedate the infants. Postpartum intravenous meperidine can slightly reduce the willingness of infants to breastfeed. Patient-controlled epidural analgesia postpartum appears to be free from these effects. Other agents, such as fentanyl, are preferred for intravenous or intramuscular use, especially while nursing a newborn or preterm infant.[1,2]

A single dose of meperidine for anesthesia or conscious sedation usually does not cause problems in older breastfed infants.[3,4] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If the mother of a newborn requires meperidine, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of meperidine to 2 to 3 days at a low dosage with close infant monitoring. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

Meperidine is metabolized to the inactive meperidinic acid and to the active metabolite normeperidine which has half the analgesic activity and at least twice the central nervous system excitatory activity of meperidine. The oral bioavailability of meperidine is about 50% in adults. Newborns have impaired meperidine metabolism and possibly a higher oral bioavailability than adults. Newborns may also experience more central nervous system depression from normeperidine than adults. The usual infant oral meperidine dose is 1 to 2 mg/kg while the usual intravenous dose is 1 mg/kg which results in neonatal plasma levels of about 200 to 500 mcg/L.

Maternal Levels. In 9 mothers who were 3 to 7 days postpartum and had received a single 50 mg intramuscular dose of meperidine, the highest measured breastmilk level was 130 mcg/L and occurred 2 hours after the dose.[5] Using the peak meperidine milk level from this study, an exclusively breastfed infant would receive about 20 mcg/kg daily of meperidine. However, normeperidine was not measured in the study.

Two breastfeeding mothers who were 8 to 72 hours postpartum and receiving about 500 mg daily of intravenous meperidine had their milk sampled 2 to 4 times over 48 to 72 hours. Relationships between dose timing and milk sampling were not stated. The reported range of measured meperidine milk levels were 165 to 311 mcg/L. Measured normeperidine milk levels were undetectable (<1.6 mcg/L) during the first 12 hours postpartum in 1 patient and reached only 66 mcg/L during the same period in the other patient. In the 36 to 72 hour postpartum period, the reported range of measured normeperidine milk levels were 151 to 333 mcg/L.[6] Using the peak meperidine milk level from this study, an exclusively breastfed infant would receive about 50 mcg/kg daily of meperidine from a maternal intravenous meperidine regimen of 500 mg per day, equal to about 6% of the maternal weight-adjusted dosage. Using the peak normeperidine milk level from this study, an exclusively breastfed infant would receive an additional 50 mcg/kg daily of normeperidine.

Five mothers who had undergone cesarean section delivery at term were given intravenous meperidine 75 mg after umbilical cord clamping and then 12.5 mg every 6 minutes via intravenous patient-controlled analgesia (PCA) as needed for up to 20 to 48 hours postpartum. When PCA meperidine was discontinued, oral meperidine 50 to 300 mg every 2 to 3 hours as needed was given. Colostrum and milk were sampled from each of the mothers 6 times over 96 hours beginning at 12 hours postpartum. Each mother's individual milk level and meperidine dose were not reported. Two mothers were able to provide enough milk in the 12 to 24 hour postpartum period, 3 were able in the 36 to 48 hour period and 4 were able in the 72 to 96 hour period. The average peak meperidine milk level was about 1100 mcg/L at 12 hours then 450, 250, 200, 150, 100 mcg/L at 24, 36, 48, 72 and 96 hours postpartum, respectively. Milk levels declined while the daily dose of intravenous meperidine in the first 36 hours postpartum remained nearly the same. The average individual cumulative intravenous meperidine dose in the first 12 hours postpartum when the peak milk level occurred was about 350 mg. The cumulative dose in the first 36 hours during mostly intravenous maternal meperidine was about 850 mg. The average cumulative oral meperidine dose over the 48 to 96 hour postpartum period was about 300 mg. The average cumulative intravenous plus oral meperidine dose over the entire 96 hours was about 1300 mg.[7] Using the peak milk level reported in this study, an exclusively breastfed infant would receive 165 mcg/kg daily of meperidine. Using the average milk levels during the first 36 hours postpartum when intravenous dosing predominated and was steady at about 25 mg per hour, an exclusively breastfed infant would receive about 56 mcg/kg daily, equal to 0.6% of the maternal weight-adjusted dosage. Using all the average milk levels reported over 96 hours postpartum, an exclusively breastfed infant would receive about 36 mcg/kg daily, also equal to 0.6% of the maternal weight-adjusted dosage. However, normeperidine was not measured in the study.

Eight breastfeeding women who were 1 month to 1 year postpartum and undergoing gynecological surgery had their milk sampled 3 times after a single intraoperative dose of intravenous meperidine. Seven of the women received 25 mg. Individual meperidine milk levels were not reported. Their average meperidine milk level was 176 mcg/L at 1 to 3 hours after the dose (range 134 to 244 mcg/L in 5 women 1 to 2 hours after the dose and 76 to 318 mcg/L in 3 women 2 to 3 hours after the dose). Only 3 of the women had detectable (>20 mcg/L) meperidine milk levels at 8 to 10 hours after the dose (range 76 to 318 mcg/L). One woman received 75 mg meperidine. Her milk level was 571 mcg/L 4 hours after the dose and 224 mcg/L 8 hours after the dose. None had detectable levels (>20 mcg/L) 24 to 28 hours after their dose. The authors determined that infants in this study received 1.2 to 3.5% of the maternal weight-adjusted dosage.[8]

Twenty women who had a cesarean section delivery were receiving patient-controlled epidural analgesia (PCEA) with meperidine for postpartum analgesia. They received aa mean meperidine dose of 15.9 mg/hour (range 3.7 to 35.2 mg/hour) and a median total dose of 4.5 mg/kg daily (range 1.1 to 7.6 mg/kg daily) during the first 35 to 46 hours postpartum. Breastmilk samples were taken within 2 hours of the end of PCEA and 6 hours later, if possible. Mean meperidine milk concentrations was 421 mcg/L in the first sample and 176 mcg/L in the second. Mean normeperidine milk concentrations was 414 mcg/L in the first sample and 373 mcg/L in the second sample. Absolute infant dosages of meperidine were 20 mcg/kg daily at the time of the first sample and 10 mcg/kg daily at the time of the second. Absolute infant dosages of normeperidine were 21 mcg/kg daily at the time of the first sample and 22 mcg/kg daily at the time of the second. The authors estimated that the combined weight-adjusted maternal dosages of meperidine plus normeperidine was 1.4% and 0.9% for the first milk sample and second sample, respectively.[9]

Infant Levels. Six breastfed and 6 bottle-fed newborns had meperidine saliva levels measured 2 to 3 hours of age before their first feeding, then again at 24 and 48 hours of age, both times 1.5 hours after a feeding. Their mothers had received a single dose of 100 mg intramuscular meperidine 3 to 4 hours prior to delivery. Meperidine saliva levels in the breastfed newborns were higher at 24 hours of age than at 2 to 3 hours of age. They then decreased slightly by 48 hours of age to levels that were still higher than at 2 to 3 hours of age. In contrast, meperidine saliva levels in the newborns that were bottle-fed decreased over the first 48 hours postpartum. Meperidine was eliminated from saliva very slowly by both groups of newborns. The authors surmised that the higher saliva meperidine levels in the breastfed newborns was caused by oral absorption of meperidine from breastmilk.[8]

Twenty breastfed (extent not stated) infants whose mothers had received patient-controlled epidural analgesia with meperidine had blood samples obtained 48 to 72 hours postpartum at about the time the maternal meperidine was discontinued. Samples were available from 17 infants and averaged 3 mcg/L for meperidine and 0.6 mcg/L of normeperidine. Compared with maternal plasma concentrations obtained at about the same time, infant meperidine and normeperidine concentrations were 1.4 and 0.4% of maternal levels.[9]

### Effects in Breastfed Infants

In 2 controlled studies, repeated maternal post-cesarean section meperidine doses, including patient-controlled analgesia, caused diminished alertness and orientation in 3- to 4-day old, breastfed infants compared to equivalent doses of morphine.[7,10]

Twenty breastfed (extent not stated) infants whose mothers had received patient-controlled epidural analgesia with meperidine for 48 to 72 hours postpartum. They were assessed with the Neurologic and Adaptive Capacity Score (NACS) at a median of 105 minutes after maternal meperidine cessation. The median NACS was 33.5 (range 24 to 38), which is similar to the average score of 35 in healthy infants with no drug effects.[9]

Mothers who were delivering by nonemergency cesarean section using spinal analgesia were given either a single dose of 100 mg of meperidine intravenously after delivery (n = 52) or routine care (n = 49), which consisted of a diclofenac 100 mg suppository. The feeding behaviors of both groups were recorded within 48 hours after delivery. Readiness for feeding in the control group was greater than the meperidine group. The mean score of feeding behavior in the meperidine group was slightly, but significantly lower than the control group at 6 and 12 hours after delivery using the infant breastfeeding assessment tool (IBFAT). Several other measures of feeding behavior were not different between the groups.[11]

### Effects on Lactation and Breastmilk

Meperidine can increase serum prolactin.[12] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed. More importantly, meperidine is likely to interfere with infant nursing behavior when given during labor.[13-15]

In one small study, women given promethazine with meperidine and secobarbital during labor, had the time to lactogenesis II prolonged by 14 hours. Women given meperidine or secobarbital without promethazine had lactogenesis II prolonged 7 hours compared to unmedicated women, but the difference was not statistically significant.[16]

A randomized, multicenter trial compared the initiation rate and duration of breastfeeding in women who received high-dose epidural bupivacaine alone, or one of two low-dose combinations of bupivacaine plus fentanyl. A nonepidural matched control group, some of whom received systemic meperidine, was also compared. Women in the nonepidural group who received systemic meperidine had a lower breastfeeding initiation rate than in the epidural or unmedicated groups.[17]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[18]

A randomized, nonblinded study compared the use of intramuscular meperidine 100 mg to intranasal (mean dose 486 mcg) or subcutaneous (mean dose 300 mcg) fentanyl for labor analgesia. More women in the meperidine group had difficulty establishing lactation (79%) than in the intranasal (39%) or subcutaneous (44%) fentanyl groups. Mothers who received meperidine reported more sedation, had longer labors, and their infants were more likely to be admitted to the nursery.[19,20]

Analysis of an Australian database of 1835 pregnant women found that the 285 women who received meperidine during labor were 41% more likely to have discontinued breastfeeding by 6 weeks of age.[21]

A study of lactose, protein, sodium and potassium concentrations in the breastmilk found slightly higher lactose concentrations in the milk of mothers who delivered vaginally and received no meperidine compared to those who had a Cesarean section followed by patient-controlled analgesia with meperidine in the first 72 hours postpartum. Between 72 and 165 hours postpartum, vaginally delivered mothers without meperidine had lower sodium and protein content and higher potassium content in milk than those who received meperidine. However, by 72 hours postpartum, both groups had evidence of adequate secretory activation.[22]

A retrospective case-control study conducted in two hospitals in central Iran compared breastfeeding behaviors in the first 2 hours postdelivery by infants of 4 groups of primiparous women with healthy, full-term singleton births who had vaginal deliveries. The groups were those who received no medications during labor, those who received oxytocin plus scopolamine, those who received oxytocin plus meperidine, and those who received oxytocin, scopolamine and meperidine. The infants in the no medication group performed better than those in all other groups, and the oxytocin plus scopolamine group performed better than the groups that had received meperidine.[23]

Use of a combination of meperidine 50 mg and levallorphan 0.625 mg (Pethilorphan) per dose intramuscularly as a last resort for severe labor pain was studied retrospectively in a hospital in Japan that did not use epidural analgesia. It was often used with hydroxyzine 50 mg or promethazine 25 mg intramuscularly. Outcomes were compared to those of women who received no meperidine. Although women who received meperidine plus levallorphan had several indications of more difficult labor and delivery, there was no difference in the rates of suckling difficulties or breastfeeding rates at discharge or 1 month postpartum between the groups. No differences between dosages of meperidine received was found.[24]

A randomized, partially blinded study in a hospital in Thailand compared intravenous meperidine and fentanyl for pain during active labor. Mothers received either meperidine 50 mg (n = 46) or fentanyl 50 mcg (n = 46) initially and then every 1 (fentanyl) or 2 (meperidine) hours as requested by the mother. The percentages of infants who breastfed in the first 24 hours were only 61% for meperidine and 54% for fentanyl, although the difference was not statistically significant. Care of the infants (e.g., skin-to-skin in the first hour) was not reported.[25]

A multicenter, prospective cohort study in Hong Kong of 1277 women who gave birth found that women who received meperidine for labor pain relief (almost 20% of women) had a 31% reduced likelihood of breastfeeding in the first hour postpartum. The difference was statistically significant. Epidural opioids did not cause this problem.[26]

A randomized study compared intravenous meperidine 50 mg to inhaled nitrous oxide for labor analgesia. A higher percentage of mothers receiving nitrous oxide were able to breastfeed immediately after birth (95% vs 88%), but the difference was not statistically significant. There were no differences in breastfeeding rates at 24 hours after delivery or formula use.[27]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Vargo JJ, Delegge MH, Feld AD, et al. Multisociety sedation curriculum for gastrointestinal endoscopy. Gastroenterology 2012;143:e18–41.22624720
2 Martin E, Vickers B, Landau R, et al. ABM Clinical Protocol #28, Peripartum analgesia and anesthesia for the breastfeeding mother. Breastfeed Med 2018;13:164–71.29595994
3 Borgatta L, Jenny RW, Gruss L, et al. Clinical significance of methohexital, meperidine, and diazepam in breast milk. J Clin Pharmacol 1997;37:186–92.9089420
4 Shergill AK, Ben-Menachem T, Chandrasekhara V, et al. Guidelines for endoscopy in pregnant and lactating women. Gastrointest Endosc 2012;76:18–24.22579258
5 Peiker G, Muller B, Ihn W, et al. Excretion of pethidine in mother's milk. Zentralbl Gynakol 1980;102:537–41.7467924
6 Quinn PG, Kuhnert BR, Kaine CJ, et al. Measurement of meperidine and normeperidine in human breast milk by selected ion monitoring. Biomed Environ Mass Spectrom 1986;13:133–5.2938653
7 Wittels B, Scott DT, Sinatra RS. Exogenous opioids in human breast milk and acute neonatal neurobehavior: A preliminary study. Anesthesiology 1990;73:864–9.2240676
8 Freeborn SF, Calvert RT, Black P, et al. Saliva and blood pethidine concentrations in the mother and the newborn baby. Br J Obstet Gynaecol 1980;87:966–9.7437369
9 Al-Tamimi Y, Ilett KF, Paech MJ, et al. Estimation of infant dose and exposure to pethidine and norpethidine via breast milk following patient-controlled epidural pethidine for analgesia post caesarean delivery. Int J Obstet Anesth 2011;20:128–34.21398109
10 Wittels B, Glosten B, Faure EA, et al. Postcesarean analgesia with both epidural morphine and intravenous patient-controlled analgesia: Neurobehavioral outcomes among nursing neonates. Anesth Analg 1997;85:600–6.9296416
11 Dejbakht M, Montaseri Z, Saem J, et al. Effect of maternal pethidine on breast feeding behavior of infants in cesarean section by spinal anesthesia: A randomized controlled trial. Arch Iran Med 2021;24:591–8.34488326
12 Onur E, Ercal T, Karslioglu I. Prolactin and cortisol levels during spontaneous and oxytocin induced labour and the effect of meperidine. Arch Gynecol Obstet 1989;244:227–32.2782950
13 Nissen E, Lilja G, Matthiesen AS, et al. Effects of maternal pethidine on infants' developing breast feeding behaviour. Acta Paediatr 1995;84:140–5.7756797
14 Nissen E, Widström AM, Lilja G, et al. Effects of routinely given pethidine during labour on infants' developing breastfeeding behaviour. Effects of dose-delivery time interval and various concentrations of pethidine/norpethidine in cord plasma. Acta Paediatr 1997;86:201–8.9055894
15 Rajan L. The impact of obstetric procedures and analgesia/anaesthesia during labour and delivery on breast feeding. Midwifery 1994;10:87–103.8057961
16 Hildebrandt HM. Maternal perception of lactogenesis time: A clinical report. J Hum Lact 1999;15:317–23.10776182
17 Wilson MJ, Macarthur C, Cooper GM, et al. Epidural analgesia and breastfeeding: A randomised controlled trial of epidural techniques with and without fentanyl and a non-epidural comparison group. Anaesthesia 2010;65:145–53.19912160
18 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167–73.24451212
19 Fleet J, Belan I, Jones MJ, et al. A comparison of fentanyl with pethidine for pain relief during childbirth: A randomised controlled trial. BJOG 2015;122:983–92.25558983
20 Fleet JA, Jones M, Belan I. The influence of intrapartum opioid use on breastfeeding experience at 6 weeks post partum: A secondary analysis. Midwifery 2017;50:106–9.28411530
21 Adams J, Frawley J, Steel A, et al. Use of pharmacological and non-pharmacological labour pain management techniques and their relationship to maternal and infant birth outcomes: Examination of a nationally representative sample of 1835 pregnant women. Midwifery 2015;31:458–63.25649472
22 Tie WJ, Gardner H, Lai CT, et al. Changes in milk composition associated with pethidine-PCEA usage after Caesarean section. Matern Child Nutr 2017;13:e12275.27040350
23 Hemati Z, Abdollahi M, Broumand S, et al. Association between newborns' breastfeeding behaviors in the first two hours after birth and drugs used for their mothers in labor. Iran J Child Neurol 2018;12:33–40.29696044
24 Kinugasa M, Miyake M, Tamai H, et al. Safety and efficacy of a combination of pethidine and levallorphan for pain relief during labor: An observational study. J Obstet Gynaecol Res 2019;45:337–44.30362203
25 Raksakulkiat S, Punpuckdeekoon P. A comparison of meperidine and fentanyl for labor pain reduction in Phramongkutklao hospital. J Med Assoc Thai 2019;102:197–202. http://www.jmatonline.com
26 Fan HSL, Wong JYH, Fong DYT, et al. Association between intrapartum factors and the time to breastfeeding initiation. Breastfeed Med 2020;15:394–400.32283038
27 Zuarez-Easton S, Zafran N, Garmi G, et al. Meperidine compared with nitrous oxide for intrapartum pain relief in multiparous patients: A randomized controlled trial. Obstet Gynecol 2023;141:4–10.36701604

## Substance Identification

### Substance Name

Meperidine

### CAS Registry Number

57-42-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Opiates